# Cisatracurium

CASRN: 96946-41-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of cisatracurium during breastfeeding. Because it is short acting, highly polar and poorly absorbed orally, it is not likely to reach the breastmilk in high concentration or to reach the bloodstream of the infant.[1,2] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. Consider using a cisatracurium product that has no benzyl alcohol preservative.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Atracurium, Rocuronium

### References

1 Spigset O. (1994). Anaesthetic agents and excretion in breast milk. Acta Anaesthesiol Scand.
2 Dalal PG, Bosak J, Berlin C. (2014). Safety of the breast-feeding infant after maternal anesthesia. Paediatr Anaesth.

## Substance Identification

### Substance Name

Cisatracurium

### CAS Registry Number

96946-41-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Muscle Relaxants

Neuromuscular Nondepolarizing Agents